# Tocilizumab

CASRN: 375823-41-9

## Drug Levels and Effects

### Summary of Use during Lactation

Only small amounts of tocilizumab were detected in breastmilk after intravenous doses in several mothers. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[1] A few mothers have breastfed their infants with undetectable infant serum levels and no reported adverse effects. Several international guidelines have stated that the drug is a low risk to the nursing infant and acceptable to use during breastfeeding.[2-4] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[5]

### Drug Levels

Maternal Levels. A woman with rheumatoid arthritis resumed tocilizumab at 5 weeks postpartum at a dose of 400 mg intravenously every month. Breastmilk concentrations were determined at 13, 18 and 22 weeks postpartum. The highest tocilizumab concentrations in milk occurred 3 days after the injection and was 68.2 mcg/L. The lowest concentration was <0.2 mcg/L at 34 days after the dose. Another mother resumed monthly tocilizumab 400 mg intravenously 9 days postpartum. Breastmilk concentrations were measured after the doses at 35 and 49 weeks postpartum. The highest concentrations occurred 3 days after the injection at 148.2 mcg/L and fell to 9 mcg/L after 28 days.[6]

A woman was treated for adult onset Still's disease with tocilizumab 400 mg every 4 weeks, prednisolone 5 mg daily and tacrolimus 2 mg daily throughout pregnancy. The tocilizumab concentration in milk at 5 days postpartum (32 days after the previous dose) was 3.4 mcg/L. Another dose was given at 6 days postpartum. At about 19 hours later the milk level was 55.4 mcg/L; at 2.8 days after the dose the milk level was 215 mcg/L; at 18 days after the dose, the milk level was 70.4 mcg/L; at 28 days after the dose and before the next dose, the level was 3.8 mcg/L. Another dose was given on day 28. At about an hour after this dose the milk level was 48 mcg/L; 3 days later, the milk level was 205 mcg/L; at 11 days after the dose, the milk level was 127 mcg/L; at 17 days after the dose it was 65 mcg/L, and at 28 days after the dose it was 4.9 mcg/L.[7]

The same authors measured trough tocilizumab concentrations in four other Japanese women with rheumatoid arthritis receiving the drug 400 mg every 4 weeks, comparing dried milk spots and liquid milk. The highest milk levels were reported on the day 3 sample and ranged from about 70 to 200 mcg/L. Levels fell to low to undetectable levels over the 28-day period. [8]

A Japanese woman was treated during pregnancy with subcutaneous tocilizumab 162 mg every 2 weeks for rheumatoid arthritis. Her last dose was 24 days before delivery. A milk level obtained 2 days after delivery contained 650 mcg/L of tocilizumab, which was 11% of the concentration in maternal blood 1 day prior to delivery.[9]

A woman with Takayasu arteritis was receiving tocilizumab 162 mg subcutaneously every 2 weeks. She collected breastmilk at 5 unspecified times during therapy. All milk samples contained between 3 and 6 mcg/L of tocilizumab.[10]

A Japanese woman with rheumatoid arthritis was receiving tocilizumab until 14 weeks of gestation. The drug was discontinued until 7 days postpartum when a dose of 350 mg of tocilizumab was administered. Tocilizumab colostrum concentrations ranged from 0.39 mg/L shortly after the dose to 0.02 mg/L at 3 days after the dose.[11]

Infant Levels. A woman was treated for adult onset Still's disease with tocilizumab 400 mg every 4 weeks, prednisolone 5 mg daily and tacrolimus 2 mg daily throughout pregnancy. She breastfed almost exclusively postpartum while tocilizumab was continued. The concentration in the umbilical cord blood was 683 mcg/L at delivery 28 days after the previous tocilizumab dose. Even though the infant was almost completely breastfed, the tocilizumab concentration in the infant's serum 5 days after delivery decreased to 177 mcg/L. By 4 weeks after delivery, tocilizumab was not detectable in the infant's serum. Another dose of tocilizumab was given at 28 days postpartum. At 55 days postpartum, tocilizumab was not detected in the infant's serum.[6]

### Effects in Breastfed Infants

A pregnancy registry in Japan reported that two mothers resumed tocilizumab therapy while nursing their infants. No adverse events were reported in the infants, but details regarding extent of nursing, infant age, etc. are lacking.[12]

Two women in Japan were treated with intravenous tocilizumab 400 mg monthly for rheumatoid arthritis while they reportedly breastfed their infants exclusively for 9 and 11 months, respectively. Neither infant experienced any adverse effects from the drugs and received all routine immunizations, including BCG without any adverse consequences.[6] It is possible that these two mothers are the same as those reported above.

Three women with rheumatoid arthritis became pregnant while taking tocilizumab. The drug was stopped for the remainder of the pregnancy, but resumed (dose not stated) postpartum. They breastfed their infants (extent not stated). No infants had any adverse effects during the first year.[12]

Three Australian women with rheumatoid arthritis were treated with tocilizumab monotherapy postpartum while taking tocilizumab (dosage not stated) and breastfeeding (extent not stated). None of their infants had any adverse outcomes at 1 year of age.[13]

A woman was treated for adult onset Still's disease with tocilizumab 400 mg every 4 weeks, prednisolone 5 mg daily and tacrolimus 2 mg daily throughout pregnancy and postpartum. She breastfed almost exclusively postpartum while tocilizumab was continued every 4 weeks. Her infant developed no serious infections and demonstrated no developmental delay as of 6 months of age. The infant's routine childhood vaccinations included Haemophilus influenzae type b conjugate, hepatitis B, diphtheria, pertussis, tetanus, inactivated polio, and 13-valent pneumococcal polysaccharide vaccines. No live vaccines were given for the first 6 months postpartum. No adverse effects such as serious infections or immune reactions were seen.[7]

A Japanese woman with rheumatoid arthritis was receiving tocilizumab until 14 weeks of gestation. The drug was discontinued until 7 days postpartum when a dose of 350 mg of tocilizumab was administered. Additional doses were apparently administered monthly thereafter, although the paper is not clear on this point. Her infant was mainly breastfed with occasional additional formula for 6 months. He developed no serious infections and there was no evidence of developmental delay. He received the Haemophilus influenzae type b conjugate, hepatitis B, diphtheria-pertussis-tetanus-inactivated polio, and 13-pneumococcal polysaccharide vaccines with no adverse effects. Live vaccines, including the rotavirus and BCG vaccines, were administered at 6 months of age with no adverse effects.[11]

A national prospective registry of patients with rheumatic diseases who were treated with biological DMARDs was conducted in Spain. One whose mothers were taking tocilizumab was breastfed (extent not stated) with no mild or severe adverse events reported in the infant.[14]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
2 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
3 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48–e88.36318966
4 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
5 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
6 Saito J, Yakuwa N, Takai C, et al. Tocilizumab concentrations in maternal serum and breast milk during breastfeeding and a safety assessment in infants: A case study. Rheumatology (Oxford) 2018;57:1499–501.29635528
7 Saito J, Yakuwa N, Kaneko K, et al. Tocilizumab during pregnancy and lactation: Drug levels in maternal serum, cord blood, breast milk and infant serum. Rheumatology (Oxford) 2019;58:1505–7.30945743
8 Saito J, Yakuwa N, Kaneko K, et al. Clinical application of the dried milk spot method for measuring tocilizumab concentrations in the breast milk of patients with rheumatoid arthritis. Int J Rheum Dis 2019;22:1130–7.30968569
9 Tada Y, Sakai M, Nakao Y, et al. Placental transfer of tocilizumab in a patient with rheumatoid arthritis. Rheumatology (Oxford) 2019;58:1694–5.31329987
10 Moriyama M, Wada Y, Minamoto T, et al. Unexpectedly lower proportion of placental transferred tocilizumab relative to whole immunoglobulin G: A case report. Scand J Rheumatol 2020;49:165–6.31436129
11 Saito J, Yakuwa N, Kaneko K, et al. Tocilizumab drug levels during pregnancy and lactation: A woman who discontinued tocilizumab therapy until the end of the first trimester and resumed it after birth. Obstet Med 2021;14:260–2.34880942
12 Nakajima K, Watanabe O, Mochizuki M, et al. Pregnancy outcomes after exposure to tocilizumab: A retrospective analysis of 61 patients in Japan. Mod Rheumatol 2016;26:667–71.26873562
13 Salonga A, Chay J, Nicholls D. A case series of patients with rheumatoid arthritis exposed to tocilizumab during pregnancy. Intern Med J 2018;48:26–7. doi:10.1111/imj.13772
14 Membrive-Jiménez C, Sánchez-Piedra C, Martínez-González O, et al. Safety and effectiveness of bDMARDs during pregnancy in patients with rheumatic diseases: Real-world data from the BIOBADASER registry. Reumatol Clin (Engl Ed) 2023;19:500–6.37945183

## Substance Identification

### Substance Name

Tocilizumab

### CAS Registry Number

375823-41-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized

Antirheumatic Agents